# Oxcarbazepine

CASRN: 28721-07-5

## Drug Levels and Effects

### Summary of Use during Lactation

Oxcarbazepine levels in breastmilk are low and it is not expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. A safety scoring system finds oxcarbazepine possible to use cautiously during breastfeeding.[1] Monitor the infant for drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsants.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women are taking a combination of anticonvulsants. Some of the other drugs (e.g., phenytoin, carbamazepine) stimulate the metabolism of other anticonvulsants whereas others (e.g., valproic acid) inhibit the metabolism of other anticonvulsants. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than usual.

Maternal Levels. Two women were treated with oxcarbazepine during pregnancy and lactation. Milk levels of the 10-hydroxy-oxcarbazepine metabolite in breastmilk were 50 to 65% of the maternal blood level in one mother during the first week postpartum. In the second mother, milk levels were 70 to 80% of maternal plasma levels during the first 2 months postpartum and 45 to 50% at 2.5 to 4.5 months postpartum. Specific values were not provided in the abstract.[2]

An epileptic woman took oxcarbazepine orally 300 mg 3 times daily during pregnancy and postpartum. Five milk levels of oxcarbazepine and its active metabolite 10-hydroxy-oxcarbazepine taken in the 6 months postpartum were about 50% of maternal blood levels which averaged 380 mcg/L and 5.7 mg/L, respectively. Therefore, milk levels averaged about 190 mcg/L for oxcarbazepine and 2.85 mg/L for 10-hydroxy-oxcarbazepine, although the authors reported that the assay method was not very accurate for breastmilk.[3]

A woman diagnosed with bipolar disorder was taking oxcarbazepine 300 mg every 12 hours (9 mg/kg) by mouth. Milk and blood samples were taken in the morning 11 hours after the previous dose twice at 8 and 23 days postpartum. Oxcarbazepine levels in milk were 0.9 and 1 mg/L, respectively and the levels of the 10-hydroxy metabolite were 5.6 and 10.4 mg/L on the 2 days, respectively. The authors estimated that a fully breastfed infant would receive between 1.5 to 1.7% of the weight-adjusted maternal dosage of oxcarbazepine and its metabolite.[4]

A woman who was receiving oxcarbazepine 150 mg twice daily during pregnancy and postpartum had an oxcarbazepine steady-state peak milk concentration of 7.8 mg/L. The exact time of the milk sample with respect to the dose was not reported.[5]

Infant Levels. Transplacentally acquired plasma levels of oxcarbazepine and 10-hydroxy-oxcarbazepine fell over a 5-day monitoring period in a newborn despite intake via breastmilk. The infant's mother was taking oxcarbazepine orally 300 mg 3 times daily.[3]

A woman diagnosed with bipolar disorder was taking oxcarbazepine 300 mg every 12 hours (9 mg/kg) by mouth. Blood samples were obtained from her breastfed infant (extent not stated) after breastfeeding (exact time not stated) on 2 occasions, at 8 and 23 days of age. The infant had serum concentrations of oxcarbazepine of 0.1 and <0.1 mg/L, respectively and serum concentrations of 10-hydroxy-oxcarbazepine of <0.1 and 0.2 mg/L at the 2 times, respectively. The infants total drug levels were <2.7 and <2.5% of the maternal serum concentrations on the two days.[4]

Two infants whose mothers were taking oxcarbazepine during pregnancy and postpartum breastfeeding (extent not stated) had blood samples at 3 to 4 weeks of age. Their serum 10-hydroxy-oxcarbazepine concentrations were about 5% of their mothers' serum concentrations.[6]

An infant was born to a mother taking oxcarbazepine 150 mg twice daily during pregnancy and postpartum. The infant's serum concentration on postnatal day 6 was 2.6 mg/L, which was about 15% that of the mother's.[5]

In a multicenter study of nursing mother-infant pairs, 6 infants had blood samples taken at about the same time as maternal blood samples. None of the infants had blood levels of oxcarbazepine above the lower limit of quantification (0.1 mg/L), measured as the active metabolite. The authors estimated the average infant oxcarbazepine serum concentration to be 0.05 mg/L, assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 0.3% (range 0.2 to 0.9%) of their mothers’ blood levels.[7]

### Effects in Breastfed Infants

Two infants were born to mothers who were taking oxcarbazepine (dosage not stated) during pregnancy and postpartum. One infant was breastfed for 1 week and the other for at least 4.5 months (extent not stated). Both infants developed normally.[2]

One infant was breastfed (extent not stated) from day 3 to at least 6 months of age during maternal therapy with oxcarbazepine 300 mg 3 times daily. Examination of the infant at 13 months of age indicated normal development with no signs of mental retardation or neurologic deficit.[3]

An epileptic woman took oxcarbazepine 600 mg twice daily throughout pregnancy and lactation. Her breastfed infant developed normally during the first 4 months of breastfeeding.[8]

A woman took oxcarbazepine monotherapy throughout pregnancy and postpartum for complex partial seizures. She breastfed her infant with some formula supplementation (extent not stated) for 6 months while taking an oxcarbazepine dosage of 900 mg twice daily. Her infant achieved all developmental milestones for the first 3 years of life.[9]

An infant was breastfed (extent not stated) for 18 weeks by a mother who took oxcarbazepine 300 mg every 12 hours (9 mg/kg) during pregnancy and postpartum. At 23 days of age, liver function tests were normal. No adverse drug effects or developmental delay were seen up to age 5 years.[4]

No adverse effects were reported in 10 newborns who were 4 to 23 days old who were breastfed during maternal intake of levetiracetam 1000 to 3000 mg daily. One mother was also taking tiagabine 30 mg daily, clobazam 45 mg daily and oxcarbazepine 600 mg daily.[10]

An infant was born to a mother taking oxcarbazepine 150 mg twice daily during pregnancy and postpartum. About 12 hours after birth, the infant developed increased excitability, irritability, limb shaking, and increased muscle tone, which occurred every few minutes. The infant was allowed to breastfeed and excitability and muscle tension appeared to be lessened somewhat after feeding, but the increased muscle tone was not improved by day 7.[5]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Phenytoin, Valproic Acid

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Pedersen B. Oxcarbazepine in breast milk. 17^th^ Epilepsy International Congress, Jerusalem Israel. 1987.
3 Bülau P, Paar WD, von Unruh GE. Pharmacokinetics of oxcarbazepine and 10-hydroxy-carbazepine in the newborn child of an oxcarbazepine-treated mother. Eur J Clin Pharmacol 1988;34:311-3.3396622
4 Lutz UC, Wiatr G, Gaertner HJ, et al. Oxcarbazepine treatment during breast-feeding: A case report. J Clin Psychopharmacol 2007;27:730-2.18004156
5 Chen CY, Li X, Ma LY, et al. In utero oxcarbazepine exposure and neonatal abstinence syndrome: Case report and brief review of the literature. Pharmacotherapy 2017;37:e71-e5.28543284
6 Öhman I, Tomson T. Pharmacokinetics of oxcarbazine in neonatal period and during lactation. Epilepsia 2009;50 (Suppl. S4):239. doi:10.1111/j.1528-1167.2009.02063.x
7 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441-50.31886825
8 Gentile S. Oxcarbazepine in pregnancy and lactation. Clin Drug Investig 2003;23:687.17535084
9 Eisenschenk S. Treatment with oxcarbazepine during pregnancy. Neurologist 2006;12:249-54.16990737
10 Tomson T, Palm R, Kallen K, et al. Pharmacokinetics of levetiracetam during pregnancy, delivery, in the neonatal period, and lactation. Epilepsia 2007;48:1111-6.17381438

## Substance Identification

### Substance Name

Oxcarbazepine

### CAS Registry Number

28721-07-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants